# Insect Repellent M 3535

CASRN: 52304-36-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the clinical use of insect repellent M 3535 (IR3535) during breastfeeding. However, the Centers for Disease Control and Prevention and U.S. Environmental Protection Agency consider IR3535 to be safe and effective during breastfeeding when used as directed. It should be used by breastfeeding women to avoid exposure to mosquito-borne viruses.[1] Avoid application directly to the nipple and other areas where the infant might directly ingest the product.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Citriodiol, Diethyltoluamide, Icaridin

### References

1. Centers for Disease Control and Prevention. Avoid bug bites. Accessed 6-27/16. http://wwwnc.cdc.gov/travel/page/avoid-bug-bites#repellent

## Substance Identification

### Substance Name

Insect Repellent M 3535

### CAS Registry Number

52304-36-6

### Drug Class

- Breast Feeding
- Lactation
- Insect Repellents